# Cloperastine

CASRN: 3703-76-2

## Drug Levels and Effects

### Summary of Use during Lactation

Cloperastine is not marketed in the United States, but is available in other countries. No information is available on the clinical use of cloperastine during breastfeeding. Long-term use of cloperastine might reduce milk production or milk letdown. During long-term use, observe for signs of decreased lactation (e.g., infant insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Codeine, Dextromethorphan

## Substance Identification

### Substance Name

Cloperastine

### CAS Registry Number

3703-76-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines

Antitussive Agents